# Floxacillin

CASRN: 5250-39-5

## Drug Levels and Effects

### Summary of Use during Lactation

Floxacillin (flucloxacillin) is not approved for marketing in the United States by the U.S. Food and Drug Administration. It is acceptable to use during breastfeeding and is frequently used abroad to treat mastitis in nursing mothers.[1-3] Limited information indicates that floxacillin levels in milk are low and are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Floxacillin is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. One report states that the manufacturer supplied information on floxacillin excretion into breastmilk. After a 250 mg oral dose, a milk level of 0.1 mg/L was measured. Further details are lacking.[4] This value is consistent with that of other penicillins.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Scott JA, Robertson M, Fitzpatrick J, et al. Occurrence of lactational mastitis and medical management: a prospective cohort study in Glasgow. Int Breastfeed J 2008;3:21.18721487
2 Dixon JM, Khan LR. Treatment of breast infection. BMJ 2011;342:d396.21317199
3 Amir LH. ABM clinical protocol #4: Mastitis, revised March 2014. Breastfeed Med 2014;9:239-43.24911394
4 Griffiths AD, Bull FE. Sweat testing for cystic fibrosis. Arch Dis Child 1978;53:918.727820

## Substance Identification

### Substance Name

Floxacillin

### CAS Registry Number

5250-39-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins